# Iomeprol

CASRN: 78649-41-9

## Drug Levels and Effects

### Summary of Use during Lactation

Iomeprol is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Labeling for the drug in the United Kingdom and guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives an iodine-containing contrast medium such as iomeprol.[1-4]

### Drug Levels

Maternal Levels. Four mothers who were 1 week to 14 months postpartum received iohexol by rapid intravenous injection. Three received a dose of 50 mL (37.8 grams; 17.5 grams of iodine) and one received 60 mL (45.3 grams; 21 grams of iodine). Milk samples of 10 mL were collected 9 times over the 48 hours after the injection. The average iohexol milk concentration over the first 24 hours was 24.6 mg/L in the 3 women 1 week to 4 months postpartum and 130.5 mg/L in the one woman who was 14 months postpartum and weaning her infant. The authors calculated that the average amount of iohexol received by the first 3 infants over the first 24 hours would be 3.7 mg/kg or 0.5% of the weight-adjusted maternal dosage.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A preterm infant, born at 31 weeks 4 days, was noted at 17 days of age to have a markedly elevated thyrotropin (TSH) value of 87.6 mUI/L (normal range: 0.27 to 4.20 mUI/L). TSH had been normal at birth. Thyroglobulin was also elevated at 811 ng/mL (normal range: 3.5 to 77 ng/mL), but free T4 was normal. The infant had been breastfed (extent not stated) from birth, but also received partial parenteral nutrition until day 10 of life. The infant’s mother had received iomeprol in a dose of 350 mg/kg of iodine at day 4 postpartum and discontinued breastfeeding for 24 hours after the dose. The mother had a history of subclinical hypothyroidism and was treated with levothyroxine.[6] The infant’s transient hypothyroidism, indicated by elevations in TSH and thyroglobulin, was probably caused by the iodine in milk from the contrast medium.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Diatrizoate

### References

1 Webb JA, Thomsen HS, Morcos SK, et al. The use of iodinated and gadolinium contrast media during pregnancy and lactation. Eur Radiol 2005;15:1234-40.15609057
2 Chen MM, Coakley FV, Kaimal A, et al. Guidelines for computed tomography and magnetic resonance imaging use during pregnancy and lactation. Obstet Gynecol 2008;112:333-40.18669732
3 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e216.28937575
4 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2023;Version 2023:120-1. https://www.acr.org/Clinical-Resources/Contrast-Manual
5 Nielsen ST, Matheson I, Rasmussen JN, et al. Excretion of iohexol and metrizoate in human breast milk. Acta Radiol 1987;28:523-6.2960342
6 Themelin C, Pierron C, Calafat JF, et al. Transient neonatal hypothyroidism secondary to postnatal maternal exposure to contrast medium. BMJ Case Rep 2019;12:e230854.31619400

## Substance Identification

### Substance Name

Iomeprol

### CAS Registry Number

78649-41-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents